# Ranibizumab

CASRN: 347396-82-1

## Drug Levels and Effects

### Summary of Use during Lactation

Milk levels of ranibizumab are very low after intravitreal injection in nursing mothers. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[1] Premature infants who have been administered ranibizumab intravitreally in both eyes for retinopathy of prematurity have had no apparent adverse effects up to the second year of life.[2] Since vascular endothelial growth factor-A (VEGF-A) is present in human milk and is thought to help in maturation of the infant’s gastrointestinal tract, concern has been raised about the maternal use of VEGF-A inhibitors during breastfeeding.[3] VEGF-A milk levels may decrease, but are not absent from milk after an injection of ranibizumab. A typical alternative to breastmilk is infant formula, which contains no VEGF-A. There appears to be no reason to withhold breastfeeding after intravitreal ranibizumab. Some sources consider ranibizumab to be the preferred intravitreal VEGF in breastfeeding because of its lower systemic exposure than other agents.[4,5]

### Drug Levels

Maternal Levels. One mother who was nursing a 16-month-old infant received an unspecified dose of ranibizumab intraocular injection for myopic choroidal neovascularization. At the time of her first dose, breastfeeding was stopped, and milk samples were obtained 1 hour before the injection and on days 1 through 7, 14, 21, and 28 after injection. Ranibizumab was undetectable (<1.6 mcg/L) for the first 2 days after injection and then was 34.7 mcg/L on day 3. On day 6, the concentration was about 55 mcg/L, then it drifted slowly up to a concentration of about 130 mcg/L on day 28 after the injection.[6]

Another mother was given ranibizumab 0.5 mg intravitreal injections for myopic choroidal neovascularization and continued to breastfeed her 1 month-old infant. A trough milk sample was taken 4 weeks after a dose and then on days 1 through 7, 14, 21, and 28 after injection. All milk samples had ranibizumab concentrations below the lower limit of quantification of 1.6 mcg/L. The investigators hypothesized that continuous nursing resulted in the low levels of ranibizumab in milk.[6]

A woman received an injection of ranibizumab 0.5 mg in each eye with a 1-week interval between eyes. Milk samples were obtained at baseline and then daily for 14 days after the first injection. Ranibizumab levels in the mother’s breast milk remained below the lower limit of quantitation of the assay at all time points.[7]

A woman who was breastfeeding her 6-month-old infant received a single intravitreal injection of ranibizumab 0.5 mg in 0.05 mL into her right eye. Serum and milk samples were obtained 1 hour prior to the injection and at 2 and 6 hours after injection, then again 1 day, 3 days, 7 days, 14 days, and 28 days after the injection. Ranibizumab was highest in serum at 1 to 3 days after the injection. The highest concentration in milk was 3.4 mcg/L one day after the injection. By 3 days after the injection, the concentration dropped to 1.5 mcg/L and remained below this level until 28 days after the injection when it was 1.8 mcg/L.[8]

Infant Levels. A woman received an injection of ranibizumab 0.5 mg in each eye with a 1-week interval between eyes. Her infant was breastfed exclusively, except for the 3 days after each injection during which formula was given exclusively. Infant blood samples were obtained daily for 11 days starting on the day before breastfeeding was resumed. Ranibizumab levels remained below the lower limit of quantitation of the assay at all time points in the infant’s serum. Plasma VEGF-A levels in the infant remained undetectable at all time points, except for days 9 and 11 when slightly low levels were found.[7]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A woman was given 3 intravitreal injections of bevacizumab for scar-associated choroidal neovascularization in her left eye. Vascular endothelial growth factor (VEGF) was measured in serum and breastmilk. After the intravitreal injection of bevacizumab, the VEGF level in breastmilk decreased from 13.3 to 8.6 mcg/L over a 2-week period. After changing therapy to ranibizumab therapy, no decrement in breastmilk VEGF was seen during the 42 days following injection.[9] It is not clear from the article if the mother continued breastfeeding after the injection.

Two women received ranibizumab intraocular injections for myopic choroidal neovascularization. In one who did not breastfeed, VEGF decreased from 22.8 mcg/L at baseline to 12.3 mcg/L on day 1 and to 4.9 mcg/L on day 28 after her dose. The second woman who did breastfeed her infant, had VEGF levels that were largely unchanged, varying between about 8 and 12 mcg/L over the 28-day follow up. The investigators hypothesized that continuous nursing resulted in the lower levels in the relative lack of VEGF reduction in milk.[6]

A woman received an injection of ranibizumab 0.5 mg in each eye with a 1-week interval between eyes. Milk samples were obtained at baseline and then daily for 14 days after the first injection. VEGF-A levels in the breast milk gradually decreased from 5266 ng/L at baseline to 1,626 pg/mL at Day 4, and then then gradually increased to 1,998 ng/L on Day 7 (when the second eye was injected), then reduced to 1,471 ng/L on Day 9, and then presented with higher and fluctuating levels from Day 12 to Day 14.[7]

The mother of a breastfed 6-month-old infant was given 4 intravitreal injections of ranibizumab 0.5 mg for choroidal neovascularization. VEGF was measured in breastmilk before the first two injections and at 1 to 3, 6, 12, 24, 48 and 72 hours after all of the injections. The greatest decrease in milk VEGF levels occurred 6 to 12 hours after each dose and was about a 40% decrease. Milk VEGF levels returned to pretreatment levels by 24 hours.[10]

A mother with macular edema and decreased visual acuity was breastfeeding a 3-week-old infant. She received intravitreal injections of ranibizumab (dose not stated) every 4 weeks for 2 doses and then every 6 weeks for 2 doses. She then received injections at intervals of 12 weeks. By 9 months postpartum she had discontinued breastfeeding. There was no indications of a developmental disorder of children up to the 2nd year of age.[11]

A woman who was breastfeeding her 6-month-old infant received a single intravitreal injection of ranibizumab 0.5 mg in 0.05 mL into her right eye. Milk samples were obtained 1 hour prior to the injection and at 2 and 6 hours after injection, then again 1 day, 3 days, 7 days, 14 days, and 28 days after the injection. The VEGF-A concentration in milk decreased from a baseline of 29.5 mcg/L to a low of 12.7 mcg/L on day 3 and gradually increased to 25.6 mcg/L on 28 days after the dose.[8]

### Alternate Drugs to Consider

(Intravitreal) Aflibercept, Bevacizumab

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
2 Fidler M, Fleck BW, Stahl A, et al. Ranibizumab population pharmacokinetics and free VEGF pharmacodynamics in preterm infants with retinopathy of prematurity in the RAINBOW trial. Transl Vis Sci Technol 2020;9:43.32855889
3 Dalal PJ, Patel AL, Carle M, et al. Review of ophthalmic and breastfeeding medicine evidence: Real and theoretical risks of intravitreal anti-VEGF administration in lactating women. Retina 2020;40:2065–9.32796446
4 Avery RL, Castellarin AA, Steinle NC, et al. Systemic pharmacokinetics and pharmacodynamics of intravitreal aflibercept, bevacizumab, and ranibizumab. Retina 2017;37:1847–58.28106709
5 Banerjee M, Moharana S, Padhy SK. Systemic effects of intravitreal anti-VEGF therapy: A review of safety across organ systems. Ophthalmol Ther 2025;14:1661–84.40478389
6 Juncal VR, Paracha Q, Bamakrid M, et al. Ranibizumab and aflibercept levels in breast milk after intravitreal injection. Ophthalmology 2020;127:278–80.31526521
7 Juncal VR, Marafon SB, Figueiredo N, et al. Benefits of a “pump-and-dump” breastfeeding strategy for an infant of a nursing mother receiving intravitreal ranibizumab. Retin Cases Brief Rep 2025;19:428–33. doi:10.1097/ICB.0000000000001607
8 Zhang J, Niu B, Wang Y, et al. Vascular endothelial growth factor-A and drug level in serum and human breast milk of a lactating woman after intravitreal injection of ranibizumab: A case report. Front Med (Lausanne) 2026;13:1730208.41695171
9 Ehlken C, Martin G, Stahl A, et al. Reduction of vascular endothelial growth factor A in human breast milk after intravitreal injection of bevacizumab but not ranibizumab. Arch Ophthalmol 2012;130:1226–7.22965611
10 Huang Y, Zhou R, Sun Z, et al. Vascular endothelial growth factor-A level in human breast milk after intravitreal injection of ranibizumab: A case report. Int Breastfeed J 2022;17:25.35361227
11 Groselli S., Bechstein L., Gabka K., et al. Anti-VEGF(anti-vascular endothelial growth factor)-Therapie bei Zentralvenenverschluss in der Stillzeit. Ophthalmologie 2023;120:751–4.35925357

## Substance Identification

### Substance Name

Ranibizumab

### CAS Registry Number

347396-82-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Angiogenesis Inhibitors